# Clorazepate

CASRN: 57109-90-7

## Drug Levels and Effects

### Summary of Use during Lactation

Clorazepate is excreted into breastmilk and appears to accumulate in the serum of breastfed infants. Because the half-life of clorazepate and its active metabolite are long, timing breastfeeding with respect to the dose is of little or no benefit in reducing infant exposure. Other agents may be preferred, especially while nursing a newborn or preterm infant. If clorazepate is used, monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Clorazepate is a prodrug of nordiazepam (desmethyldiazepam) which is the primary active metabolite of diazepam.

Maternal Levels. After a single 20 mg intramuscular dose of clorazepate in 7 women, milk nordiazepam levels ranged from 7.5 to 15.5 mcg/L at 2 days after the dose and 6 to 12 mcg/L at 4 days after the dose.[1]

Infant Levels. Nordiazepam has been found in infants' serum in levels higher than milk levels, indicating accumulation, and only slightly lower than adult therapeutic levels after diazepam use by the mother.[2,3]

After a single 20 mg intramuscular dose of clorazepate in 7 women, serum levels of their breastfed infants ranged from trace levels in 5 of the infants to 4 and 7.5 mcg/L in the others on the second day after the dose. On the fourth day after the dose, infant serum levels was a trace amounts in one and ranged from 4 to 8.5 mcg/L in the others, indicating accumulation in infant serum.[1]

### Effects in Breastfed Infants

Sedation in infants has been reported during maternal use of diazepam which has nordiazepam as its active metabolite.[3,4] Concern has also been expressed that nordiazepam may compete with bilirubin for hepatic glucuronide conjugation in the neonate.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Anxiety) Lorazepam, Oxazepam, Temazepam (Seizure Disorder) Carbamazepine, Divalproex, Gabapentin, Lamotrigine, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 Rey E, Giraux P, d'Athis P, et al. Pharmacokinetics of the placental transfer and distribution of clorazepate and its metabolite nordiazepam into the feto-placental unit and in the neonate. Eur J Clin Pharmacol 1979;15:181-5.37090
2 Erkkola R, Kanto J. Diazepam and breast-feeding. Lancet 1972;299:1235-6.4113217
3 Wesson DR, Camber S, Harkey M, Smith DE. Diazepam and desmethyldiazepam in breast milk. J Psychoactive Drugs 1985;17:55-6.3920372
4 Patrick MJ, Tilstone WJ, Reavey P. Diazepam and breast-feeding. Lancet 1972;299:542-3.4110044

## Substance Identification

### Substance Name

Clorazepate

### CAS Registry Number

57109-90-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives

Anti-Anxiety Agents

Benzodiazepines